# Sauropus androgynus

## Drug Levels and Effects

### Summary of Use during Lactation

Sauropus androgynus (Breynia androgyna) is used as a food and medicinal plant in South and Southeast Asia. The leaves are used as a galactogogue in Indonesia and Malaysia where it is called katuk or cangkok.[1,2] It is high in provitamin A carotenoids, vitamins C and E and several minerals. It also has a high content of polyphenols and flavonoids, especially quercetin and kaempferol. Other major components are squalene E, linolenic acid, camphor, borneol, 4-terpineol, 8-cymenol, α-terpineol, carvacrol methyl ether, carvenone, sabinene hydrate acetate, thymol, α-terpinene acetate, carvacrol, butylated hydroxytoluene, cedrol, and β-carotene.[3,4] Animal studies indicate that Sauropus androgynus increased the expression of prolactin and oxytocin genes in lactating mice.[5] Human studies of Sauropus androgynus as a galactogogue contain serious design deficiencies and do not necessarily prove that Sauropus is a galactogogue.

Excessive ingestion of fresh Sauropus androgynus leaves can cause bronchiolitis obliterans, which is potentially fatal. Most patients were young and middle-aged women (mean age 39 years). Cooked leaves may not result in similar toxicity.[4,5] In one study, 3 to 5% of women who received Sauropus had elevations of liver enzymes.[6]

### Drug Levels

No components of Sauropus androgynus have been measured in milk after its ingestion, but some components have been measured after the ingestion of other foods.

Maternal Levels. Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Kaempferol concentrations ranged from 7.8 to 71.4 nmol/L, increasing from weeks 1 to 13 (and from weeks 4 to 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[7]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A nonblinded, multicenter study in Indonesia gave healthy mothers of newborns either Sauropus androgynus (katuk) 300 mg tablets 3 times daily and a vitamin and mineral supplement once daily for 15 days (n = 48). A control group received only the vitamin-mineral supplement (n = 48). At the age of 18 or 19 days, the baby’s weight before and after breastfeeding was measured for 24 hours to calculate breast milk volume. Milk samples were also analyzed for protein and fat content. The group that received the katuk tablets produced 264 mL of milk compared to 198 mL of milk in the group that received only the vitamin-mineral supplement. The increases in milk supply from baseline were 199 mL in the treatment group compared to 132 mL in the control group. These differences were statistically significant. There were no statistically significant differences in milk fat or protein content. This study suffers from a lack of a true placebo and blinding and unequal treatment of the two groups (intervention 3 times daily vs once daily).[1]

A nonrandomized, nonblinded study gave one group of mothers one capsule of Sauropus leaf extract twice daily for 30 days and another group of mothers nothing. At the end of 30 days, 70% of the mothers taking the Sauropus exceeded the milk production needed by their infants while only 6.7% of the untreated mothers did.[9] This study has so may design flaws that the results are meaningless.

A nonrandomized, nonblinded study in Indonesia gave 28 mothers of infants 3 to 30 days of age biscuits made of mung bean combined with star gooseberry (Sauropus androgynus). The control group of 27 mothers was given mung bean flour biscuits. All mothers ate 5 biscuits daily for 30 days, although this was not confirmed by investigators. No mention was made of whether breastfeeding was exclusive, or some babies were given supplements. The intervention group had significantly more vitamin A and fat in their diet than the control group, but about the same caloric intake. Mothers reported dietary intake and infant weight. Infant weights were similar at the start of the study, but the infants in the intervention group had gained 75 grams (7.5%) more weight at the end of the study than in the control group.[10] With all the flaws in design and reporting, this study cannot be considered to be valid.

A randomized, nonblinded and non-placebo-controlled trial gave postpartum mothers (n = 30) a mixture containing Sauropus androgynus extract, papaya leaves, mung beans, tamarind and sugar. One bottle of 400 mL of the mixture was taken daily for 4 weeks postpartum. A control group (n = 30) received breastfeeding counseling only. The amount of breastmilk produced was estimated weekly for 4 weeks by weighing mothers before and after feeding, although it is unclear how this was done and by whom. Daily milk production in the third week (801 vs 656 mL) and fourth week postpartum (909 vs 757 mL) was significantly greater in the women who consumed the galactogogue mixture.[11] The control group had markedly more primiparous mothers (50% vs 17%) than the galactogogue group and were not provided a placebo, which might largely explain the results.

A nonblinded study gave 37 primigravida mothers who breastfed healthy infants less than 40 days of age a food consisting of 150 grams each of Sauropus androgynus, Moringa oleifera and Vigna cylindrica (L) Skeels (Herbarium Medanense, Indonesia) 3 times daily for 7 days. Their infants were scored based on 6 parameters: Frequency of urination, color of urine, frequency of bowel movements, color and characteristics of stool, and the infant’s weight. The total value of these parameters increased from an average score of 4 before the intervention to a score of 5 at the end.[12] Although the authors claimed that this indicated improved breastmilk production, this scale is not validated and could have been affected by numerous variables. This study does not indicate a galactogogue effect of the product. A double-blind-randomized study compared primiparous mothers who received biscuits containing 900 mg of Sauropus androgynus extract (n = 22) to mothers who received placebo biscuits (n = 23). Mothers ate 9 biscuits a day for 14 days. Participants exclusively breastfed their healthy full-term, single babies with birth weights of 2500 grams or greater. Serum prolactin levels were measured between 7 to 10 am at baseline and on day 15. At the end of the study, the serum prolactin levels of the control group had fallen by 17% whereas the serum prolactin in the treatment group had increased by 6%, which was statistically significant.[13]

A nonblinded study in Indonesia randomized postpartum women with perceived low milk supply to either an herbal decoction containing 25 grams Sauropus androgynus (katuk) leaves, 10 grams Coleus amboinicus (torbangun) leaves and 5 grams papaya leaves (n = 60) or to 500 mg Sauropus androgynus extract (CV Al-Ghuroba, Indonesia; n = 60). Patients were to take the product and weigh their infant twice daily for 28 days. Maternal serum prolactin was measured on day 14 and 28. Breast milk volume and infant’s weight increased on days 14 and 28, and serum prolactin levels in decreased in both groups; however, the changes were not statistically significant. Mean infant weights increased, with no difference between the two treatments. Two mothers in the combination group and 3 in the extract group had increases in aspartate aminotransferase and/or alanine aminotransferase.[6]

A non-blinded study compared the sufficiency of milk production in a group of 21 mothers before and after taking boiled Sauropus leaves. The amount of leaves and duration of treatment were not specified. The definition of endpoints was not given, and the paper did not specify who or how they were judged. The amount of milk that mothers produced increased after the treatment, but milk production normally increases with time postpartum. This paper proves nothing about the galactogogue effect of Sauropus.[14]

### References

1 Sa’roni, Sadjiman T, Sja’bani M, . Effectiveness of the Sauropus Androgynus (L.) Merr leaf extract in increasing mother’s breast milk production. Media Penelitian dan Pengembangan Kesehatan 2004;14:20-4.
2 Panjaitan RGP, Aprilianti M, Titin, . Genetic potential of medicinal plants and their role in improving colostrum production in Dayak Kanayatn tribe, Bengkayang Regency, Indonesia. Sabrao Journal of Breeding and Genetics 2025;57:115-25. doi:10.54910/sabrao2025.57.1.12
3 Swain D, Sahoo BK, Pattanaik A, . Pharmacological and biotechnological overview of Sauropus androgynus L. Merr.: An underexploited perennial shrub. J Appl Biol Biotechnol 2024;12:21-8. doi:10.7324/jabb.2024.177942
4 Roshini KV, Pandian P, Vijayaraghavan C. Pharmacognostical and pharmacological properties of Sauropus androgynus: An updated review. International Journal of Ayurvedic Medicine 2026;17:333-42. doi:10.47552/ijam.v17i2.6614
5 Zhang BD, Cheng JX, Zhang CF, . Sauropus androgynus L. Merr.-A phytochemical, pharmacological and toxicological review. J Ethnopharmacol 2020;257:112778.32205260
6 Zulkarnain Z, Fitriani U, Ardiyanto D, . Galactagogue activity of poly-herbal decoction from Indonesia: A randomized open label controlled trial. J Complement Integr Med 2024;21:532-9.38644615
7 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195-202.23237648
8 Romaszko E, Wiczkowski W, Romaszko J, . Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221-8.23963751
9 Suwanti E, Kuswati K. Pengaruh konsumsi ekstrak daun katuk terhadap kecukupan asi pada ibu menyusui di klaten. Jurnal Ilmu Kesehatan 2016;5:132-5. doi:10.37341/interest.v5i2.42
10 Zipora R ER, Ahmad M, Hidayanty H, . The effect of biscuit made with mung beans (Vigna radiata), and star gooseberry (Sauropus androgynous) leaves on infant weight. Eur J Mol Clin Med 2020;7:3725-36. https://www.ejmcm.com/archives/volume-7/issue-8/12529
11 Ngadiarti I, Agestika L, Srimiati M, . Sauropus androgynus, papaya leaves, and mung beans as mixed galactagogue drink for urban postpartum mothers. Jurnal Gizi Dan Pangan 2021;16:101-8. doi:10.25182/jgp.2021.16.2.101-108
12 Wuryandari AG, Ariasih IN, Julaecha. The influence of consuming Sauropus androgynus L. Merr, Moringa oleifera Lam, and Vigna cylindrica (L) Skeels on breastfeeding mothers: Randomized controlled trial. NSC Nursing 2022 doi:10.32549/OPI-NSC-73
13 Indrayani D, Shahib MN, Husin F. The effect of katuk (Sauropus androgunus (L) Merr) leaf biscuit on increasing prolactine (sic) levels of breastfeeding mother. Jurnal Kesehatan Masyarakat 2020;16:1-7. doi:10.15294/kemas.v16i1.11324
14 Amrayani A, Nur IL, Rantung M, . The effect of decorated Sauropus androgynus leaves on increasing breast milk production in breastfeeding mothers at the Mawea public health center, North Halmahera regency. International Journal of Health Medicine and Current Research-Ijhmcr 2025;10:2528-34. doi:10.22301/ijhmcr.2528-2534.2253

## Substance Identification

### Substance Name

Sauropus androgynus

### Scientific Name

Sauropus androgynus; Breynia androgyna

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal